# Chasteberry

CASRN: 91722-47-3

## Drug Levels and Effects

### Summary of Use during Lactation

Chasteberry (Vitex agnus-castus) is the fruit (berries) from the chaste tree. The berries contain essential oils (e.g., limonene, sabinene, 1,8-cineole [eucalyptol]), iridoid glycosides (e.g., agnoside, aucubin), diterpines (e.g., vitexilactone, rotundifuran), and flavonoids (e.g., apigenin, castican, orientin, isovitexin). Chasteberry is often used for irregularities of the menstrual cycle, infertility, premenstrual complaints, and cyclical breast pain.[1,2] Some constituents, possibly the diterpene clerodadienols, bind to dopamine D2 receptors in the pituitary.[3] In low doses, chasteberry increases serum prolactin and it is a purported galactogogue;[4-7] however, no scientifically valid clinical trials support this use. Furthermore, some evidence indicates that high doses of chasteberry decrease serum prolactin and might decrease lactation.[8] Chasteberry has been used to decrease breastmilk oversupply in Persian traditional medicine.[9] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[10,11]

In general, chasteberry is well tolerated. The most frequent adverse events are nausea, headache, gastrointestinal disturbances, menstrual disorders, acne, pruritus, and erythematous rash; however, all are mild and reversible. Among 352 nursing mothers given chasteberry tincture, 15 cases of pruritus, exanthema, urticaria, and some cases of early menstrual period occurred. Because of concerning safety data and possible lactation suppression, chasteberry should be avoided during lactation.[12]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Twelve nursing mothers who were19 weeks to 19 months postpartum ingested 100 mg of 1,8 cineole (eucalyptol) in the form of delayed-release capsules (Soledum-Klosterfrau Vertriebs GmbH, Germany) that release the drug in the intestine. Then they pumped 1 to 4 milk samples at the time they perceived the smell of eucalyptus on their breath which had been previously shown to be approximately concurrent. A total of 21 milk samples were obtained. Odor was rated by a panel of 3 to 5 experts as either smelling like eucalyptus or not. Fourteen of the samples had a distinct eucalyptus-like odor. Chemical analysis of the positive odor tests found 1,8-cineole in concentrations from 70 to about 2090 mcg/kg of milk, most in the range of 100 to 500 mcg/kg of milk. Samples with negative odor tests contained concentrations in the range of 0.98 to about 20.23 mcg/kg of milk. In one woman who donated 3 samples, the highest concentration of 71 mcg/kg occurred at 1.5 hours after ingestion, with concentrations of 1 mcg/kg before ingestion and 15 mcg/kg at 9.5 hours after ingestion.[13]

Eight women had their milk analyzed for 1,8-cineole metabolites. Ten metabolites and several enantiomers of these metabolites were detected.[14,15]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[16]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 400 mcg of 1,8-cineole. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. 1,8-Cineole reached its maximum concentration in milk after 1 hour in three participants, after 2 hours in four participants, after 3 hours in three participants, after 4 hours in three participants after 5 hours in three participants, after 6 hours in three participants and after 8 hours in one participant. Peak milk 1,8-cineole concentrations ranged from 0.98 to 10.1 mcg/L.[17]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nursing mothers who were participating in an experiment on the excretion of 1,8-cineole (eucalyptol) in breastmilk took a 100 mg capsule of 1,8-cineole orally. Although instructed not to, 12 mothers breastfed their infants during the experiment. Mothers reported that none of their infants refused their milk or breastfed less than usual. Two mothers felt that their infants were more agitated a few hours after breastfeeding. A third mother reported that the infant stopped nursing from time to time and "looked puzzled", but resumed nursing. Upon repeating the experiment 6 weeks later, the infant did not react in an unusual way during breastfeeding.[13]

### Effects on Lactation and Breastmilk

In an old, uncontrolled, nonblinded case series, Agnus castus oligoplex (Madaus [Germany]) was used to increase lactation. One hundred twenty-five hospitalized postpartum mothers were given the product, which was obtained from the seed of the chaste tree, in a dosage of 30 drops 3 times a day. In cases with poor response the dose was increased to 30 and 50 drops a day. Of the 125 mothers, 100 responded and left the hospital nursing their infants. Of these, 61% nursed completely, and 39% only partially. Most of the latter were primiparous women or women who had not nursed their first child. The drug reportedly lost its effectiveness over time.[18] The methodology used in this paper does not meet current standards and cannot be considered as proof of a galactogogue effects of chasteberry.

A nonrandomized, partially blinded study compared a chasteberry preparation (Agnolyt, Madaus [Germany]) 15 drops 3 times daily to one tablet of thiamine 3 times daily in postpartum mothers. Milk production was measured by the average change in weight of infants of 353 mothers treated with chasteberry, 102 cases were treated with thiamine, and 362 untreated patients served as controls. No difference in milk production was noted until about 14 days postpartum. After that time, the mothers who received chasteberry had greater milk production than those in the other groups. The effect appeared to be greater in patients with cesarean section or complications such as fever.[19] The methodology used in this study does not meet current standards and cannot be considered as proof of a galactogogue effects of chasteberry.

A double-blind study of 52 women with hyperprolactinemia compared 20 mg daily of a chasteberry preparation (Strotan, Stroschein Pharma [Germany]) to placebo. After 3 months of therapy, the prolactin response to intravenous thyrotropin releasing hormone was reduced and menstrual irregularities were reduced in the subjects taking chasteberry.[20]

In an open study of 20 healthy males, a special Agnus castus extract (BP1095E1, equivalent to 40 mg extract of chasteberry) was studied in doses of 120 mg, 240 mg and 480 mg daily in 3 divided doses. Each subject received placebo and each of the doses for 14 days, followed by 1 drug-free week. Total prolactin secretion was measured on the last day of each study period. Following stimulation by thyrotropin releasing hormone, the 120 mg dose increased serum prolactin by an average of about 16% and the 480 mg dose decreased prolactin by an average of about 10%; the 240 mg dose was approximately neutral with respect to placebo.[21]

A randomized study compared chasteberry extract 40 mg daily (Agnucaston, Biomeks [Germany]) to bromocriptine 2.5 mg twice daily in 2 groups of 40 women. One group had mild hyperprolactinemia and the other had cyclic mastalgia. After 3 months of treatment, serum prolactin on day 3 to 5 of the menstrual cycle decreased by an average of 44% to 47% in all groups. No statistical difference was found between the 2 treatments in their prolactin-lowering effect.[22]

An 18-year old woman with amenorrhea, galactorrhea, and an elevated serum prolactin caused by a microprolactinoma began taking 15 drops of a chasteberry preparation containing 9 grams of chasteberry tincture per 100 grams of solution (Agnolyt, Madaus [Germany]) each morning. After 3 months her menstrual cycle had normalized, galactorrhea had ceased, and serum prolactin had decreased by 27% (although still elevated).[23]

### References

1 Dennehy C. The use of herbs and dietary supplements in gynecology: an evidence-based review. J Midwifery Womens Health 2006;51:402-9.17081929
2 Kress D, Thanner E. Treatment of mastopathy: The lowest possible risk. Med Klin 1981;76:566-7.7345363
3 Wuttke W, Jarry H, Christoffel V, et al. Chaste tree (Vitex agnus-castus)--pharmacology and clinical indications. Phytomedicine 2003;10:348-57.12809367
4 Scott C, Jacobson H. A selection of international nutritional and herbal remedies for breastfeeding concerns. Midwifery Today Int Midwife 2005;75:38-9.16320878
5 Jackson P. Complementary and alternative methods of increasing breast milk supply for lactating mothers of infants in the NICU. Neonatal Netw 2010;29:225-30.20630837
6 Javan R, Javadi B, Feyzabadi Z. Breastfeeding: A review of its physiology and galactogogue plants in view of traditional Persian medicine. Breastfeed Med 2017;12:401-9.28714737
7 Erarslan Z, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
8 Eglash A. Treatment of maternal hypergalactia. Breastfeed Med 2014;9:423-5.25361472
9 Kabiri M, Kamalinejad M, Sohrabvand F, et al. Management of breast milk oversupply in traditional Persian medicine. J Evid Based Complementary Altern Med 2017;22:1044-50.28817945
10 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
11 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
12 Daniele C, Thompson C, J, Pittler M, et al. Vitex agnus castus: A systematic review of adverse events. Drug Saf 2005;28:319-32.15783241
13 Kirsch F, Beauchamp J, Buettner A. Time-dependent aroma changes in breast milk after oral intake of a pharmacological preparation containing 1,8-cineole. Clin Nutr 2012;31:682-92.22405404
14 Kirsch F, Buettner A. Characterisation of the metabolites of 1,8-cineole transferred into human milk: Concentrations and ratio of enantiomers. Metabolites 2013;3:47-71.24957890
15 Kirsch F, Horst K, Rohrig W, et al. Tracing metabolite profiles in human milk: Studies on the odorant 1,8-cineole transferred into breast milk after oral intake. Metabolomics 2013;3:47-71. doi:10.1007/s11306-012-0466-9
16 Debong M, N'Diaye K, Owsienko D, et al. Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
17 Debong M, Homm I, Gigl M, et al. Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198
18 Noack M. Our experience with Agnus castus oligoplex for increasing lactation. Dtsch Med Wochenschr 1943;69:204-6.
19 Mohr H. [Clinical investigations of means to increase lactation]. Dtsch Med Wschr 1954;79:1513-6.13220106
20 Milewicz A, Gejdel E, Sworen H, et al. Vitex agnus castus extract in the treatment of luteal phase defects due to latent hyperprolactinemia. Results of a randomized placebo-controlled double-blind study. Arzneimittelforschung 1993;43:752-6.8369008
21 Merz P, Gorkow C, Schrodter A, et al. The effects of a special Agnus castus extract (BP1095E1) on prolactin secretion in healthy male subjects. Exp Clin Endocrinol Diabetes 1996;104:447-53.9021345
22 Kilicdag E, Tarim E, Bagis T, et al. Fructus agni casti and bromocriptine for treatment of hyperprolactinemia and mastalgia. Int J Gynaecol Obstet 2004;85:292-3.15145274
23 Gallagher J, Lynch F, Barragry J. A prolactinoma masked by a herbal remedy. Eur J Obstet Gynecol Reprod Biol 2008;137:257-8.17298863

## Substance Identification

### Substance Name

Chasteberry

### Scientific Name

Vitex agnus-castus

### CAS Registry Number

91722-47-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal